# Captopril

CASRN: 62571-86-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of captopril in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. The average peak milk level in 11 subjects (time postpartum not stated) taking oral captopril 100 mg 3 times daily was 4.7 mcg/L and occurred 3.8 hours after the dose. The peak milk level was about 1% of the peak plasma level, while average milk levels over 12 hours following a dose were about 3% of average serum levels.[1] Based on data in this study, the maximum daily dosage that a nursing infant would receive is less than 0.014% of the mother's weight-adjusted daily dosage.

There was no evidence of disulfide captopril metabolites in the breastmilk of a woman (time postpartum not stated) taking the drug chronically.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In one report of 12 mothers, several continued to breastfeed their infants while taking captopril 100 mg three times daily. No adverse effects were seen in the infants.[1]

A woman was diagnosed with Cushing's disease during pregnancy. Postpartum she took metyrapone 250 mg 3 times daily, bisoprolol 10 mg twice daily, and captopril 12.5 mg twice daily. She breastfed her preterm infant about 50% milk and 50% formula. At 5 weeks postpartum, the infant's pediatric team found his growth and development to be appropriate.[3]

### Effects on Lactation and Breastmilk

In a series of controlled studies reported in one paper, captopril had no effect on the circadian rhythm of prolactin, the response to prolactin-stimulating drugs or serum prolactin in patients with prolactin-secreting tumors.[4]

In a study of young hypertensive males, captopril 25 mg orally markedly decreased serum prolactin at 90 minutes after the dose compared to placebo.[5] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In one report, 1 woman out of 12 subjects was unable to produce enough milk for the study while taking captopril 100 mg 3 times daily even though she had been successfully breastfeeding for 6 months.[1] It is not known if this decrease was an effect of captopril.

### Alternate Drugs to Consider

Candesartan, Benazepril, Enalapril, Lisinopril, Quinapril, Valsartan

### References

1 Devlin RG, Fleiss PM. Captopril in human blood and breast milk. J Clin Pharmacol 1981;21:110-3.7014657
2 Drummer OH, Jarrott B. The disposition and metabolism of captopril. Med Res Rev 1986;6:86-90.3005787
3 Duke ME, Britten FL, Pretorius CJ, et al. Maternal metyrapone use during breastfeeding: Safe for the breastfed infant. J Endocr Soc 2019;3:973-8.31041428
4 Denolle T, Rohmer V, Saint-Adnre JP, et al. Effect of the circulating renin-angiotensin system on prolactin release in humans. J Clin Endocrinol Metab 1990;70:288-92.2104627
5 Saito I, Takeshita E, Hayashi S, et al. Effect of captopril on plasma prolactin in patients with essential hypertension. Angiology 1990;41:377-81.2192585

## Substance Identification

### Substance Name

Captopril

### CAS Registry Number

62571-86-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors